# Fluorescein

CASRN: 2321-07-5

## Drug Levels and Effects

### Summary of Use during Lactation

Because absorption from the eye is limited, fluorescein would not be expected to cause any adverse effects in breastfed infants. To substantially diminish the amount of drug that reaches the breastmilk after using eye drops, place pressure over the tear duct by the corner of the eye for 1 minute or more, then remove the excess solution with an absorbent tissue.

After intravenous use in a nursing mother, milk levels and the dose received by the infant are much higher than with ophthalmic use. It is unlikely that these higher levels are problematic for most infants, but exposure to intense light, such as phototherapy, should probably be avoided for a few days after the maternal dose. Fluorescein injection is transferred into human milk for up to 4 days following IV administration.

### Drug Levels

Maternal Levels. A woman received 5 mL of 10% fluorescein (500 mg) injection shortly after delivering a set of twins. Milk samples were obtained periodically by manual expression for 76 hours after the dose. The highest concentration of 372 mcg/L was obtained in the first sample 6 hours after the dose. By 76 hours after the dose, the milk fluorescein concentration was 170 mcg/L. The half-life of fluorescein in milk was 62 hours.[1]

A mother nursing a 3-month-old infant had 2% fluorescein drops applied into each eye. Blood and milk samples were taken 3 times at 30-minute intervals after the dose. Milk levels at these times were 20, 22 and 15 mcg/L, respectively.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Maguire AM, Bennett J. Fluorescein elimination in human breast milk. Arch Ophthalmol 1988;106:718-9.3369981
2 Mattern J, Mayer PR. Excretion of fluorescein into breast milk. Am J Ophthalmol 1990;109:598-9.2333925

## Substance Identification

### Substance Name

Fluorescein

### CAS Registry Number

2321-07-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contrast Media

Diagnostic Agents

Fluorescent Dyes